# Carrot

## Drug Levels and Effects

### Summary of Use during Lactation

Carrots (Daucus carota) contain alpha- and beta-carotene. A poultice of raw carrots applied to the breast has been used to treat uncomplicated breast engorgement during breastfeeding;[1,2] however, evidence of efficacy is lacking because engorgement tends to improve over time regardless of treatment.[3] Carrots and the closely related wild carrots have been used as galactogogues, but valid scientific evidence for this use is lacking.[4] In Angola and Malawi, women are advised to drink carrot juice as a galactogogue.[5] No scientifically valid clinical trials support the use of carrots as a galactogogue. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[6,7]

Carotenoids (beta-carotene, lutein, lycopene, zeaxanthin) and carrot flavor are transmitted into breastmilk. Carrot intake can improve maternal and breastmilk beta-carotene and vitamin A status,[8,9] but excessive maternal intake of carrots can lead to a harmless, reversible discoloration of the breastfed infant's skin. Many women believe that infant crying and fussiness is related to abdominal pain linked to feeding, and had eliminated items, such as carrots, from their diet in an attempt to change infant behavior, although there is no good evidence to support this assumption.[10] Moderately good evidence supports that maternal intake of carrots during early breastfeeding will improve their infant’s liking of carrots later in life.[11-13]

### Drug Levels

Maternal Levels. Beta-carotene is a normal component of breastmilk and supplementation of nursing mothers with beta-carotene supplements increases the concentration in breastmilk.[14-17] However, beta-carotene from carrots and other vegetables are less bioavailable than from pharmaceutical supplements.[9]

A sensory panel of at least 8 participants smelled the breastmilk of 5 mothers who had been given 500 mL of carrot juice. The consensus of a panel was that the odor of carrots was strongest 2 hours after ingesting the carrot juice. The mothers were presented with timed samples of their own breastmilk and judged that the taste of carrot was strongest at 3 hours after carrot juice ingestion.[11]

Twelve women were given fresh carrot paste containing 15 mg of all-trans beta-carotene daily for 3 days. Milk samples were collected on 3 days at least 3 hours after the meal that contained beta-carotene. Milk beta-carotene levels increased by an average of about 80% over the 3-day period.[18]

A study of 39 mothers of preterm infants (24 to 34 weeks gestation) provided 184 milk and 21 plasma samples weekly up to 6 weeks postpartum. Mean lutein, zeaxanthin, beta-carotene, and lycopene concentration decreased as lactation progressed, with the highest concentrations in colostrum. Lycopene (41%) and beta-carotene (36%) were the predominant carotenoids in colostrum and for up to 2 weeks postpartum. The proportion of lutein and zeaxanthin increased with lactation duration to account for 45% of the carotenoids in mature milk.[19]

Infant Levels. In a study of 39 mothers and their preterm infants (24 to 34 weeks gestation), 21 blood samples were obtained from infants at 6 weeks of age. The carotenoid concentrations averaged as follows: lutein 76.2 mcg/l, beta-carotene 24.5 mcg/L, zeaxanthin 13.6 mcg/L and lycopene 11 mcg/L. No correlation was observed in carotenoid content between maternal milk and infant plasma at 6 weeks postpartum.[19]

### Effects in Breastfed Infants

A nursing mother was eating 2 to 3 pounds of carrots a week as raw and cooked carrots. The mother's skin was yellow in color, but her sclera were clear. At 2 months of age, her breastfed infant was diagnosed as having jaundice because of a yellow coloration of the skin. Breastfeeding was discontinued and the infant's skin returned to a normal color. The mother continued her diet and examination of the maternal serum found elevated levels of beta-carotene which was probably the cause of her infant's skin discoloration.[20]

Nursing mothers ingested either 300 mL of carrot juice (n = 20) or water (n = 18) 2 to 3 hours before nursing daily for a week. Their infants were then evaluated for their acceptance of cereal prepared with either carrot juice or water. The infants who had been exposed to carrots in breastmilk consumed less flavored cereal relative to plain cereal than the control infants and they spent less time feeding. The authors interpreted these results to be a form of sensory-specific satiety in which the infants become less responsive to a flavor that they have been extensively exposed to in the very recent past.[11]

Seventeen nursing mothers were given 300 mL of carrot juice or water for 4 days per week for 3 consecutive weeks during the first 2 months of lactation. Other study groups received carrot juice during the last trimester of pregnancy or water during pregnancy and breastfeeding as a placebo. At a mean of 5.6 months of age, the infants were evaluated twice, once with cereal prepared with carrot juice and once with cereal prepared with water. Infants whose mothers received carrot juice during lactation scored higher on measures of acceptance of carrot-flavored cereal and took in more cereal than those whose mothers received water, but the latter difference did not reach statistical significance. These effects were similar, but stronger among infants exposed prenatally.[13]

### Effects on Lactation and Breastmilk

In an on-line survey of mothers who noted changes in color of their breastmilk, 41 women attributed the change in color to carrots. The most commonly reported color changes were yellow or green.[21]

### References

1 Stapleton H. The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery 1995;1:165–7.9456733
2 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93–100. doi:10.1089/act.1997.3.93
3 Mangesi L, Zakarija-Grkovic I. Treatments for breast engorgement during lactation. Cochrane Database Syst Rev 2016;6:CD006946.27351423
4 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
5 Brahmi F, Kampemba Mujinga F, Guendouze N, et al. Benefits of traditional medicinal plants to African women's health: An overview of the literature. Diseases 2025;13:160.40422592
6 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
7 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
8 Ncube TN, Greiner T, Malaba LC, et al. Supplementing lactating women with pureed papaya and grated carrots improved vitamin A status in a placebo-controlled trial. J Nutr 2001;131:1497–502.11340106
9 Strobel M, Tinz J, Biesalski HK. The importance of beta-carotene as a source of vitamin A with special regard to pregnant and breastfeeding women. Eur J Nutr 2007;46:I1–20.17665093
10 Kidd M, Hnatiuk M, Barber J, et al. "Something is wrong with your milk": Qualitative study of maternal dietary restriction and beliefs about infant colic. Can Fam Physician 2019;65:204–11.30867180
11 Mennella JA, Beauchamp GK. Experience with a flavor in the mother's milk modifies the infant's acceptance of flavored cereal. Dev Psychobiol 1999;35:197–203.10531532
12 Spahn JM, Callahan EH, Spill MK, et al. Influence of maternal diet on flavor transfer to amniotic fluid and breast milk and children's responses: A systematic review. Am J Clin Nutr 2019;109 (Suppl 7):1003s–26s.30982867
13 Mennella JA, Jagnow CP, Beauchamp GK. Prenatal and postnatal flavor learning by human infants. Pediatrics 2001;107:E88.11389286
14 Johnson EJ, Qin J, Krinsky NI, et al. Beta-carotene isomers in human serum, breast milk and buccal mucosa cells after continuous oral doses of all-trans and 9-cis beta-carotene. J Nutr 1997;127:1993–9.9311956
15 Canfield LM, Giuliano AR, Neilson EM, et al. beta-Carotene in breast milk and serum is increased after a single beta-carotene dose. Am J Clin Nutr 1997;66:52–61.9209169
16 Mollik AH. Plants from Sundarbans to the diet of lactating mothers during puerperium of Barguna district of Bangladesh. Pediatr Nephrol 2010;25:1904. doi:10.1007/s00467-010-1577-z
17 Gossage CP, Deyhim M, Yamini S, et al. Carotenoid composition of human milk during the first month postpartum and the response to beta-carotene supplementation. Am J Clin Nutr 2002;76:193–7.12081834
18 Haftel L, Berkovich Z, Reifen R. Elevated milk beta-carotene and lycopene after carrot and tomato paste supplementation. Nutrition 2015;31:443–5.25701332
19 Uretzky A, Mandel D, Schwartz A, et al. Longitudinal analysis of carotenoid content in preterm human milk. Eur J Pediatr 2024;183:2671–82.38509232
20 Thomson ML. Carotinaemia in a suckling. Arch Dis Child 1943;18:112.21032250
21 Trehan S, Wszołek K, Rook A, et al. Colorful concerns: Exploring perceived reasons for and maternal-infant reactions to human milk color changes through a cross-sectional study. J Hum Lact 2026:8903344261431671.42080305

## Substance Identification

### Substance Name

Carrot

### Scientific Name

Daucus carota

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal